# Omaveloxolone

CASRN: 1474034-05-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of omaveloxolone during breastfeeding. Because it is 97% protein bound, exposure of the breastfed infant is likely to be low. Until more data become available, omaveloxolone should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Omaveloxolone

### CAS Registry Number

1474034-05-3

### Drug Class

Breast Feeding

Lactation

Milk, Human